# Sotatercept

CASRN: 1001080-50-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of during breastfeeding. Because sotatercept is a large protein molecule with a molecular weight of 78,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. The manufacturer recommends that breastfeeding be discontinued during sotatercept therapy and for 4 months after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Pulmonary Artery Hypertension) Bosentan, Epoprostenol, Nitric Oxide, Sildenafil, Treprostinil

## Substance Identification

### Substance Name

Sotatercept

### CAS Registry Number

1001080-50-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Cardiovascular Agents

Recombinant Fusion Proteins

Vasodilator Agents